# Diclofenac

CASRN: 15307-86-5

## Drug Levels and Effects

### Summary of Use during Lactation

Data on excretion of diclofenac into milk are poor, but the drug has a short half-life and little glucuronide metabolite formation. Levels in milk appear to be quite low. Most reviewers consider diclofenac to be acceptable during breastfeeding.[1-5] Other agents having more published information may be preferred, especially while nursing a newborn or preterm infant.[6]

Maternal use of diclofenac topical gel or eye drops would not be expected to cause any adverse effects in breastfed infants. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Diclofenac was undetectable (<100 mcg/L) in the breastmilk over a 6-hour period after a 50 mg intramuscular injection in 6 women.[7]

Six mothers were given oral diclofenac 100 mg daily for one week postpartum. The drug was undetectable (<10 mcg/L) in milk of any of 59 samples of milk collected (collection times unspecified).[7]

A woman treated with 150 mg daily of diclofenac had a breastmilk diclofenac level of 100 mcg/L, equivalent to about 0.03 mg/kg daily for the infant.[8]

Fifteen women taking diclofenac 25 mg orally (n = 11) or a 50 mg suppositories (n = 4) for postpartum pain donated a total of 20 milk samples for analysis at random times at 5 to 6 days postpartum. Nine of the women taking oral diclofenac had undetectable (<0.5 mcg/L) milk concentrations at times ranging from 2 to 64 hours after a dose. Milk levels from 0.84 to 3.89 mcg/L were found in 4 milk samples at times ranging from 3 to 10 hours after a dose. In the 4 women taking a 50 mg suppository, 3 milk diclofenac levels ranged from 0.56 to 1.63 mcg/L at times ranging from 7 to 16.5 hours after a dose. In one woman, diclofenac was undetectable in milk 54 hours after a dose.[9] Note that this paper does not state the number of doses taken prior to sampling, so steady-state is not guaranteed. The pharmacokinetic analysis of samples was performed in an invalid way, and pharmacokinetic parameters reported in the paper are therefore not valid.

### Effects in Breastfed Infants

In one study, 30 mothers undergoing elective cesarean section were allowed to use 25 mg diclofenac suppositories along with either spinal or spinal and epidural anesthesia with a local anesthetic after delivery. The spinal anesthetic group used an average of 56 mg of diclofenac on the day of delivery and 33 mg on the next day whereas the women receiving both spinal and epidural anesthesia used 21 and 18 mg. No mention was made of adverse effects on the breastfed infants.[10]

A breastfed infant developed urticaria on day 15 of life. Her mother had been taking diclofenac (dosage unspecified) for pain since her cesarean section delivery. Diclofenac is a possible cause of the urticaria; however, the infant had also received hepatitis B vaccination 7 days before and the authors thought that it was a more likely cause of the reaction.[11]

A trial in women who received a cesarean section randomized participants to receive 2 tablets of acetaminophen 325 mg and tramadol 35.5 mg (Zaldiar, Gruenthal, Israel) every 6 hours as well as diclofenac 100 mg at 12, 24 and 48 hours after arrival in the maternity ward, either as a fixed dose or the same drugs on demand. No differences were noted in neonatal outcomes of peak bilirubin, need for phototherapy, and adverse effects, including irritability or altered consciousness. No adverse infant effects were seen.[12]

### Effects on Lactation and Breastmilk

A trial in women who received a cesarean section randomized participants to receive 2 tablets of acetaminophen 325 mg and tramadol 35.5 mg (Zaldiar, Gruenthal, Israel) every 6 hours as well as diclofenac 100 mg at 12, 24 and 48 hours after arrival in the maternity ward, either as a fixed dose or the same drugs on demand. Patients on the fixed dose regimen had more breastfeeds (23.8 vs 19.2) and fewer instances of formula (8.2 vs 11.9) than the on demand group.[12]

A randomized, double-blind study was performed in pregnant women scheduled for cesarean section under spinal anesthesia with bupivacaine and fentanyl. Patients received either 100 mg diclofenac (n = 100), 100 mg tramadol (n = 100) or placebo (glycerin suppositories) n = 100, all given as rectal suppositories every 8 hours for the first 24 hours after surgery. The time to initiate breastfeeding was significantly shorter among mothers who received diclofenac than a placebo, 1.5 vs 4.1 hours with breastfeeding support and 3.5 vs 6.2 hours without support. Diclofenac was slightly more effective than tramadol among mothers who received no support (3.5 vs 3.7 hours).[13]

### Alternate Drugs to Consider

(Systemic) Acetaminophen, Celecoxib, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Brooks PM, Needs CJ. Antirheumatic drugs in pregnancy and lactation. Baillieres Clin Rheumatol 1990;4:157–71.2282661
2 Østensen ME. Safety of non-steroidal anti-inflammatory drugs during pregnancy and lactation. Inflammopharmacology 1996;4:31–41. doi:10.1007/BF02735557
3 Spigset O, Hägg S. Analgesics and breast-feeding: Safety considerations. Paediatr Drugs 2000;2:223–38.10937472
4 Janssen NM, Genta MS. The effects of immunosuppressive and anti-inflammatory medications on fertility, pregnancy and lactation. Arch Intern Med 2000;160:610–9.10724046
5 MacGregor EA. Migraine in pregnancy and lactation. Neurol Sci 2014;35 (Suppl 1):61–4.24867839
6 Davanzo R, Bua J, Paloni G, et al. Breastfeeding and migraine drugs. Eur J Clin Pharmacol 2014;70:1313–24.25217187
7 Sioufi A, Stierlin H, Schweizer A, et al. Recent findings concerning clinically relevant pharmacokinetics of diclofenac sodium In: Kåss E, ed. Voltaren--new findings. Bern: Hans Huber Publishers; 1982:19–30.
8 Todd PA, Sorkin EM. Diclofenac sodium. A reappraisal of its pharmacodynamic and pharmacokinetic properties, and therapeutic efficacy. Drugs 1988;35:244–85.3286213
9 Tamaki R, Noshiro K, Furugen A, et al. Breast milk concentrations of acetaminophen and diclofenac - unexpectedly high mammary transfer of the general-purpose drug acetaminophen. BMC Pregnancy Childbirth 2024;24:90.38287321
10 Hirose M, Hara Y, Hosokawa T, et al. The effect of postoperative analgesia with continuous epidural bupivacaine after cesarean section on the amount of breast feeding and infant weight gain. Anesth Analg 1996;82:1166–9.8638785
11 De Cerqueira AM, De Azevedo JO, Guimaraes MB, et al. Urticaria in a newborn. J Am Acad Dermatol 2009;60 (3 Suppl 1):AB148. doi:10.1016/j.jaad.2008.11.652
12 Yefet E, Taha H, Salim R, et al. Fixed time interval compared with on-demand oral analgesia protocols for post-caesarean pain: A randomised controlled trial. BJOG 2017;124:1063–70.28236348
13 Hooda R, Malik N, Pathak P, et al. Impact of postoperative pain on early initiation of breastfeeding and ambulation after cesarean section: A randomized trial. Breastfeed Med 2023;18:132–7.36800334

## Substance Identification

### Substance Name

Diclofenac

### CAS Registry Number

15307-86-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal